# Fluocinolone

CASRN: 807-38-5

## Drug Levels and Effects

### Summary of Use during Lactation

Fluocinolone has not been studied during breastfeeding. Since only extensive application of the most potent corticosteroids may cause systemic effects in the mother, it is unlikely that short-term application of topical corticosteroids would pose a risk to the breastfed infant by passage into breastmilk. However, it would be prudent to use the least potent drug on the smallest area of skin possible. It is particularly important to ensure that the infant’s skin does not come into direct contact with the areas of skin that have been treated. Only the lower potency corticosteroids should be used on the nipple or areola where the infant could directly ingest the drugs from the skin. Only water-miscible cream or gel products should be applied to the breast because ointments may expose the infant to high levels of mineral paraffins via licking.[1] Any topical corticosteroid should be wiped off thoroughly prior to nursing if it is being applied to the breast or nipple area.

Maternal use of ear drops, or eye insert that contains fluocinolone presents negligible risk for the nursing infant. Most expert opinion is that fluocinolone acetonide implants can be used for diabetic macular edema in nursing mothers.[2]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Topical application of a corticosteroid with relatively high mineralocorticoid activity (isofluprednone acetate) to the mother’s nipples resulted in prolonged QT interval, cushingoid appearance, severe hypertension, decreased growth and electrolyte abnormalities in her 2-month-old breastfed infant. The mother had used the cream since birth for painful nipples.[3]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Topical) Hydrocortisone, Topical, Triamcinolone, Topical

### References

1 Noti A, Grob K, Biedermann M, . Exposure of babies to C(15)-C(45) mineral paraffins from human milk and breast salves. Regul Toxicol Pharmacol 2003;38:317–25.14623482
2 Kolomeyer AM, Eichenbaum DA, Kiernan DF, . The 0.19-mg fluocinolone acetonide implant for the treatment of diabetic macular edema: An expert consensus. Ophthalmic Surg Lasers Imaging Retina 2023;54:166–73.36944067
3 De Stefano P, Bongo IG, Borgna-Pignatti C, . Factitious hypertension with mineralocorticoid excess in an infant. Helv Paediatr Acta 1983;38:185–9.6874387

## Substance Identification

### Substance Name

Fluocinolone

### CAS Registry Number

807-38-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Corticosteroids, Topical

Glucocorticoids

Anti-Inflammatory Agents